# Bendamustine

CASRN: 16506-27-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of bendamustine during breastfeeding. Most sources consider breastfeeding to be contraindicated during maternal antineoplastic drug therapy, especially alkylating agents such as bendamustine.[1] Based on the half-life of the drug and its metabolites, the drug should be eliminated from the milk by 24 to 48 hours after the last dose. The manufacturer recommends that breastfeeding be discontinued during bendamustine therapy and for at least 1 week after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Some evidence indicates that the closely related drug carmustine can increase serum prolactin.[2]

### References

1 Pistilli B, Bellettini G, Giovannetti E, et al. (2013). Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding?. Cancer Treat Rev.
2 Constine LS, Rubin P, Woolf PD, et al. (1987). Hyperprolactinemia and hypothyroidism following cytotoxic therapy for central nervous system malignancies. J Clin Oncol.

## Substance Identification

### Substance Name

Bendamustine

### CAS Registry Number

16506-27-7

### Drug Class

Breast Feeding

Lactation

Antineoplastic Agents, Alkylating

Nitrosourea Compounds